# Pimozide

CASRN: 2062-78-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with pimozide during breastfeeding, other drugs are preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Pimozide can cause hyperprolactinemia.[1,2] The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway.[3]

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Delitala G, Masala A, Alagna S. Suppression of pimozide-induced prolaction secretion by piridoxine (vitamin B_6_). Biomedicine 1977;27:190-2
2 Fiore L, Scapagnini U, Canonico PL. Effect of dihydroergocryptine and dihydroergocristine on cyclic AMP accumulation and prolactin release in vitro: Evidence for a dopaminomimetic action. Horm Res 1987;25:171-7 3032757
3 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56-62 11913677

## Substance Identification

### Substance Name

Pimozide

### CAS Registry Number

2062-78-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents